# Mirvetuximab Soravtansine

CASRN: 1453084-37-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of mirvetuximab soravtansine during breastfeeding. Because mirvetuximab is a large protein molecule with a molecular weight of 150,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] However, mirvetuximab is conjugated with the small-molecule toxin, mafodotin, which might be excreted into milk. The manufacturer recommends that breastfeeding be discontinued during therapy and for 1 month after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Mirvetuximab Soravtansine

### CAS Registry Number

1453084-37-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunoconjugates

Antibodies, Monoclonal, Humanized

Antineoplastic Agents